# Nalidixic Acid

CASRN: 389-08-2

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of nalidixic acid up to 2 grams daily produce low levels in milk and would usually not be expected to cause any adverse effects in breastfed infants with monitoring of the infant for possible effects on the gastrointestinal flora, such as diarrhea or candidiasis (thrush, diaper rash). Nalidixic acid should be avoided while breastfeeding a glucose-6-phosphate dehydrogenase (G6PD) deficient infant. Other agents are preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. One paper reported old, unpublished data obtained from the manufacturer in which a breastmilk concentration of 2 mg/L was found at an unspecified time in 4 women taking nalidixic acid 1 gram orally 4 times daily.[1]

Thirteen lactating women were given 2 grams of nalidixic acid as a single dose between the third and eighth day postpartum. The average concentration of nalidixic acid in milk during the first four-hour collection period was 0.64 mg/L (range 0.3 to 1.1 mg/L); concentration in milk from other collection periods were as follows: 0.43 mg/L at 4 to 7 hours; 0.2 mg/L at 7 to 10.5 hours; 0.1 mg/L at 10.5 to 16 hours and 0.02 mg/L at 16 to 24 hours after the dose. Using the peak milk level data from this study, the authors estimated that an exclusively breastfed infant would receive a maximum of 300 mcg daily with this maternal dosage regimen, or less than 0.3% of an infant dose.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Decreased weight gain, pallor, jaundice occurred in a 16-day-old infant probably caused by hemolytic anemia induced by maternal use of nalidixic acid orally 1 gram four times daily and amobarbital 65 mg orally three times daily. The infant developed jaundice, hyperbilirubinemia, reticulocytosis, eosinophilia, Heinz bodies and other signs of hemolysis 7 days after its mother was started on nalidixic acid. No G-6-PD deficiency or hemoglobin Zurich could be demonstrated.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ciprofloxacin, Levofloxacin, Nitrofurantoin, Trimethoprim

### References

1 Belton EM, Jones RV. Haemolytic anaemia due to nalidixic acid. Lancet 1965;286:691 4158226
2 Traeger A, Peiker G. Excretion of nalidixic acid via mother's milk. Arch Toxicol Suppl 1980;4:388-90 6933944

## Substance Identification

### Substance Name

Nalidixic Acid

### CAS Registry Number

389-08-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents, Urinary

Antibacterial Agents

Quinolones